# Levocarnitine

CASRN: 541-15-1; 3040-38-8; 17298-37-2

## Drug Levels and Effects

### Summary of Use during Lactation

Levocarnitine and acetyl-l-carnitine (acetlycarnitine) are normal components of human milk that are required for fat metabolism. The body can use only levocarnitine; dextrocarnitine can be an antagonist of levocarnitine. Acetyl-l-carnitine, and propionyl-l-carnitine can be converted to levocarnitine by the body. The bioavailability of levocarnitine is less than 20%, but acetlycarnitine and propionlycarnitine may be higher. These substances have no specific lactation-related uses. Within the normal range of dietary intake, excretion of levocarnitine into breastmilk is relatively constant. Women with carnitine deficiency appear to secrete insufficient amounts of carnitine into their breastmilk for their breastfed infants, who may require levocarnitine supplementation.[1] Preterm infants are often deficient in levocarnitine and require supplementation.[2] No data exist on the safety and efficacy levocarnitine supplementation in nursing mothers or infants without carnitine deficiency. Levocarnitine and its derivatives are generally well tolerated in adults with occasional gastrointestinal upset and restlessness. A fishy odor to the breath, sweat and urine has been reported. Although data are very limited, poor bioavailability might limit absorption by the breastfed infant. It appears unlikely that maternal levocarnitine supplements during nursing would be harmful to the infant, but until more data are available, it is probably best to avoid levocarnitine supplementation unless a healthcare professional prescribes it.

### Drug Levels

Levocarnitine and acetlycarnitine are normal components of breastmilk, and are transported into milk via organic cation transporters.[3] As of the revision date, no published information was found regarding breastmilk levels following levocarnitine used as a dietary supplement by nursing mothers.

Maternal Levels. A woman diagnosed with carnitine uptake deficiency following the birth of her infant was given oral carnitine 500 mg 3 times daily. This dose failed to increase her breastmilk carnitine concentration, with a persistently low concentration of 3.4 mg/L (21 micromoles/L) before supplementation and after 18 days of supplementation.[1]

The carnitine concentration was measured in the breastmilk of 27 normal mothers who were not taking carnitine as a supplement. Average carnitine concentrations were 10.1 mg/L over the first 21 days postpartum, which was higher than the maternal serum concentration. The concentration decreased by about 50% by postpartum days 40 to 50. No difference in concentration was found between fore- and hindmilk.[4] Another study in normal mothers found a similar average carnitine concentration of 10.6 mg/L.[5]

In a study that followed 37 healthy, nonsmoking mothers who were not taking carnitine as a supplement, carnitine and acetylcarnitine in breastmilk were measured over time. Immediately postpartum, the average milk carnitine concentration was 12.6 mg/L and acetylcarnitine was 5.7 mg/L. From 2 months postpartum to 12 months postpartum, carnitine and acetylcarnitine milk concentrations were lower, in the range of 6.1 to 8.9 mg/L for carnitine and 1.2 to 2 mg/L for acetylcarnitine.[6]

Ten mothers of full-term infants and mothers of preterm infants (36 weeks gestation or less) provided blood and milk samples for measurement of carnitine at 4 times during the first month postpartum. None were taking carnitine as a supplement. In the mothers of full-term infants, total breastmilk carnitine averaged 11.7 mg/L at 2 to 3 days postpartum, 11.8 mg/L at 5 to 7 days postpartum, 11.3 mg/L at 2 weeks postpartum, and 10.5 mg/L at 4 weeks postpartum. About one-third to one-half of the carnitine was free carnitine and the remainder was acetylcarnitine. Breastmilk concentrations were about 50 to 100% greater than simultaneous plasma concentrations. The mothers of preterm infants had higher breastmilk carnitine levels, averaging about 12 mg/L throughout the first month postpartum.[7]

Carnitine and acetylcarnitine were measured in the breastmilk of 14 lactating women who were 1 to 10 months postpartum and not taking carnitine as a supplement. The average milk concentration of free carnitine was 5.9 mg/L and of total carnitine was 7.2 mg/L. Maternal dietary intake of carnitine had no effect on breastmilk carnitine concentrations. The authors estimated that an exclusively breastfed infant would receive about 6 mg daily of carnitine from breastmilk.[8]

Infant Levels. A retrospective study of 12,000 (6,000 male and 6,000 female) breastfed neonates in Greece found that carnitine and it various esters in the serum of 3-day-old infants was related to their birth weight. In general, levels of carnitine and its esters increased with increasing birthweight, although the differences between birthweight groups varied by ester.[9]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Studinski AL, Pino GB, Grycki E, et al. Correlation of plasma and breast milk carnitine levels and the effect of carnitine supplementation in a lactating woman with carnitine uptake deficiency (CUD). Mol Genet Metab 2011;102:315. doi:10.1016/j.ymgme.2010.11.160
2 Pekala J, Patkowska-Sokola B, Bodkowski R, et al. L-carnitine - Metabolic functions and meaning in humans life. Curr Drug Metab 2011;12:667-78.21561431
3 Kwok B, Yamauchi A, Rajesan R, et al. Carnitine/xenobiotics transporters in the human mammary gland epithelia, MCF12A. Am J Physiol Regul Integr Comp Physiol 2006;290:R793-802.16195500
4 Sandor A, Pecsuvac K, Kerner J, et al. On carnitine content of the human breast milk. Pediatr Res 1982;16:89-91.7058085
5 Cederblad G, Svenningsen N. Plasma carnitine and breast milk carnitine intake in premature infants. J Pediatr Gastroenterol Nutr 1986;5:616-21.3735012
6 Rovamo LM, Salmenpera L, Arjomaa P, et al. Carnitine during prolonged breast feeding. Pediatr Res 1986;20:806-9.3737295
7 Penn D, Dolderer M, Schmidt-Sommerfeld E. Carnitine concentrations in the milk of different species and infant formulas. Biol Neonate 1987;52:70-9.3651516
8 Mitchell ME, Snyder EA. Dietary carnitine effects on carnitine concentrations in urine and milk in lactating women. Am J Clin Nutr 1991;54:814-20.1951151
9 Manta-Vogli PD, Schulpis KH, Loukas YL, et al. Perinatal free carnitine and short chain acylcarnitine blood concentrations in 12,000 full-term breastfed newborns in relation to their birth weight. Pediatr Neonatol 2020;61:620-8.32771364

## Substance Identification

### Substance Name

Levocarnitine

### CAS Registry Number

541-15-1; 3040-38-8; 17298-37-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies